# Esomeprazole

CASRN: 119141-88-7

## Drug Levels and Effects

### Summary of Use during Lactation

Esomeprazole is the S-enantiomer of the proton-pump inhibitor, omeprazole. Limited information indicates that maternal doses of 10 mg daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. A woman with rheumatoid arthritis was treated with oral esomeprazole 10 mg (0.17 mg/kg), prednisone 2.5 mg and sulfasalazine 1 gram once daily as well as injections of certolizumab pegol 200 mg every 2 weeks. Milk samples were measured several times during the first 4 days postpartum at 0.7, 4, and 8.2 hours after various doses, milk levels were 10.5 mcg/L, 19.6 mcg/L and 3 mcg/L, respectively. At 8, 10.5 and 19.4 hours after various doses, the drug was undetectable (<0.1 mcg/L) in milk. Using the highest measured level of 19.6 mcg/L, the authors calculated that a fully breastfed infant would receive a dose of 0.003 mg/kg daily, which would result in a maximum weight-adjusted dose of 1.8% of the mothers dose.[1]

Infant Levels. A woman with rheumatoid arthritis was treated with oral esomeprazole 10 mg (0.17 mg/kg) once daily. Her infant was about 50% breastfed and 50% formula fed. At 12.5 hours after the dose on the day of the infant’s birth, the cord blood level was 14.8 mcg/L, representing placental passage. By 23.2 hours after the mother’s previous dose (12 hours postpartum), esomeprazole was undetectable (<0.1 mcg/L) in the infant’s serum.[1]

### Effects in Breastfed Infants

One mother taking omeprazole 20 mg daily orally pumped and discarded her milk once each day 4 hours after her morning dose. She breastfed her infant the remainder of the day for 3 months before weaning. The infant remained well at 12 months of age.[2]

A woman with rheumatoid arthritis was treated with oral esomeprazole 10 mg, prednisone 2.5 mg and sulfasalazine 1 gram once daily as well as injections of certolizumab pegol 200 mg every 2 weeks. Her infant was about 50% breastfed and 50% formula fed. The infant had no detectable drug-related adverse effects.[1]

### Effects on Lactation and Breastmilk

Omeprazole (the racemic form) has been reported to cause gynecomastia in several men and a retrospective claims database study in the United States found that users of proton pump inhibitors had an increased risk of gynecomastia.[3,4]

A review article reported that a search of database from the European Pharmacovigilance Centre found 45 cases of gynecomastia, 9 cases of galactorrhea, 19 cases of breast pain and 12 cases of breast enlargement associated with esomeprazole. A search of the WHO global pharmacovigilance database found 114 cases of gynecomastia, 38 cases of galactorrhea, 56 cases of breast pain and 28 cases of breast enlargement associated with esomeprazole.[5]

One woman developed elevated serum prolactin and estradiol with bilateral galactorrhea one week after starting esomeprazole 40 mg once daily for reflux esophagitis. The galactorrhea disappeared 3 days after discontinuing esomeprazole and prolactin and estradiol returned to normal 7 days after discontinuation. One month later, the patient restarted esomeprazole and again developed bilateral galactorrhea. She was switched to lansoprazole with no galactorrhea developing.[6] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Antacids, Cimetidine, Famotidine, Omeprazole, Pantoprazole, Sucralfate

### References

1 Saito J, Yakuwa N, Sandaiji N, et al. (2020). Esomeprazole during pregnancy and lactation: Esomeprazole levels in maternal serum, cord blood, breast milk, and the infant's serum. Breastfeed Med.
2 Marshall JK, Thompson AB, Armstrong D. (1998). Omeprazole for refractory gastroesophageal reflux disease during pregnancy and lactation. Can J Gastroenterol.
3 Carvajal A, Macias D, Gutierrez A, et al. (2007). Gynaecomastia associated with proton pump inhibitors: A case series from the Spanish Pharmacovigilance System. Drug Saf.
4 He B, Carleton B, Etminan M. (2019). Risk of gynecomastia with users of proton pump inhibitors. Pharmacotherapy.
5 Ashfaq M, Haroon MZ, Alkahraman YM. (2022). Proton pump inhibitors therapy and risk of hyperprolactinemia with associated sexual disorders. Endocr Regul.
6 Pipaliya N, Solanke D, Rathi C, et al. (2016). Esomeprazole induced galactorrhea: A novel side effect. Clin J Gastroenterol.

## Substance Identification

### Substance Name

Esomeprazole

### CAS Registry Number

119141-88-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Ulcer Agents

Gastrointestinal Agents

Proton Pump Inhibitors